# Aprocitentan

CASRN: 1103522-45-7

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of aprocitentan during breastfeeding. Because aprocitentan is more than 99% bound to plasma proteins, the amount in milk is likely to be low. However, its half-life is 41 hours and it might accumulate in the infant. Because no information is available on the use of aprocitentan during breastfeeding, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Aprocitentan

### CAS Registry Number

1103522-45-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antihypertensive Agents

Endothelin Receptor Antagonists